# Flumazenil

CASRN: 78755-81-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of flumazenil during breastfeeding. Because flumazenil is not orally absorbed it is unlikely to adversely affect the breastfed infant. If the mother requires flumazenil, it is not a reason to discontinue breastfeeding. The half-life of the drug is 54 minutes, so withholding breastfeeding for 4 to 5 hours after a dose should minimize transfer to the infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Flumazenil

### CAS Registry Number

78755-81-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidotes

GABA Modulators

Benzodiazepines